# Rimantadine

CASRN: 13392-28-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on rimantadine during breastfeeding. The manufacturer states that the drug should not be used during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Influenza) Oseltamivir, Zanamivir

## Substance Identification

### Substance Name

Rimantadine

### CAS Registry Number

13392-28-4

### Drug Class

Breast Feeding

Lactation

Antiviral Agents

Nucleic Acid Synthesis Inhibitors